# Coenzyme Q10

CASRN: 1339-63-5

## Drug Levels and Effects

### Summary of Use during Lactation

Coenzyme Q10 (ubiquinone) is a normal part of the diet, and is also endogenously synthesized. It is a normal component of human milk, but milk levels are slightly low in the breastmilk of mothers with preterm infants. Coenzyme Q10 has no specific lactation-related uses and no data exist on the safety and efficacy of supplementation in nursing mothers or infants. Coenzyme Q10 supplements are usually well tolerated with only infrequent, minor side effects.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Milk levels of coenzyme Q10 have not been measured after exogenous administration in humans. Coenzyme Q10 is a normal component of human milk; however, values appear to vary depending on the country in which they are measured, possibly because of dietary, genetic or other population differences as well as assay differences.[1]

Maternal Levels. A study in 15 Italian mothers found a mean milk coenzyme Q10 concentrations of 1.6 mg/L at 4 days postpartum, compared to a maternal plasma concentration of 1.29 mg/L at the time of delivery.[2]

Coenzyme Q10 milk levels were measured in 23 German women who were between 24 to 48 hours postpartum, and again at 7 and 14 days postpartum. Milk levels were 1.1, 1.0 and 0.9 mg/L, respectively, at those times. The study found no correlation between maternal plasma levels and milk coenzyme Q10 levels in mature milk.[3]

Coenzyme Q10 milk levels were measured in 30 Spanish women on days 3, 8 and 30 postpartum. Half had delivered preterm infants and the other half had delivered fullterm infants. The estimated intake of coenzyme Q10 from food diaries were 3.2 mg daily in the preterm group and 2.7 mg daily in the fullterm group. In the preterm group, milk levels were 0.43, 0.39 and 0.36 mg/L, respectively, at those times. In the fullterm group, milk levels were 0.69, 0.65 and 0.47 mg/L, respectively, at those times.[4]

Forty-three breastmilk samples were obtained from 32 Japanese women during the first 8 days postpartum. The mean coenzyme Q10 concentration was 0.35 mcg/L.[5]

Thirty-nine lactating women in the United States donated 194 samples of breastmilk for analysis. The average milk concentration of coenzyme Q10 was 0.27 mcg/L.[1]

Infant Levels. Plasma concentrations of coenzyme Q10 have not been measured in the plasma of breastfed infants after maternal supplementation. However, a study in 15 Italian mothers and their breastfed infants found infant coenzyme Q10 plasma concentrations of 49 mg/L at 4 days and 0.41 mg/L at 4 weeks of age. The mean maternal coenzyme Q10 plasma concentration at delivery was 1.29 mg/L.[2]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Tang PH, Miles MV, Steele P, et al. (2006). Determination of coenzyme Q(10) in human breast milk by high-performance liquid chromatography. Biomed Chromatogr.
2 Compagnoni G, Giuffre B, Lista G, et al. (2004). CoQ10 plasmatic levels in breast-fed infants compared to formula-fed infants. Biol Neonate.
3 Niklowitz P, Menke T, Giffei J, et al. (2005). Coenzyme Q10 in maternal plasma and milk throughout early lactation. Biofactors.
4 Quiles JL, Ochoa JJ, Ramírez-Tortosa MC, et al. (2006). Coenzyme Q concentration and total antioxidant capacity of human milk at different stages of lactation in mothers of preterm and full-term infants. Free Radic Res.
5 Todoroki Y, Tsukahara H, Ohshima Y, et al. (2005). Concentrations of thioredoxin, a redox-regulating protein, in umbilical cord blood and breast milk. Free Radic Res.

## Substance Identification

### Substance Name

Coenzyme Q10

### Scientific Name

Ubiquinone

### CAS Registry Number

1339-63-5

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Coenzymes